# Bromocriptine

CASRN: 25614-03-3

## Drug Levels and Effects

### Summary of Use during Lactation

Bromocriptine is usually not used during breastfeeding because it suppresses lactation. The indication of lactation suppression has been withdrawn in the U.S. and discouraged in other countries because it increases the risk of maternal stroke, seizures, cardiovascular disorders, death and possibly psychosis.[1-4] A low dose of 2.5 mg once daily has been used for 3 days to decrease overproduction of milk.[5] The drug was undetectable in milk with this dosage and infants had no adverse reactions, but the safety of this use is not clearly established. Postpartum women may clear bromocriptine more rapidly than others.[6]

Case reports and series also exist of mothers treated with bromocriptine for amenorrhea-galactorrhea syndrome or prolactinoma during pregnancy and lactation who successfully breastfed their infants. Bromocriptine has been used to treat persistent galactorrhea following breast augmentation surgery.[7] It has also been used to mitigate hyperprolactinemia and galactorrhea caused by antipsychotic therapy.[8]

### Drug Levels

Maternal Levels. In 14 women given bromocriptine 2.5 mg once daily, the drug was undetectable (<0.2 mcg/L) in breastmilk on consecutive 3 days, but the times with respect to the doses were not stated.[9]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

No adverse effects were noticed in 14 breastfed infants of mothers who were given oral bromocriptine 2.5 mg once daily for 3 days beginning on day 5 postpartum to decrease overproduction of milk.[9]

In a case series of 40 women with pituitary adenoma and hyperprolactinemia, 30 of the women took bromocriptine 2.5 or 5 mg daily during pregnancy. Thirty of the 40 women breastfed their infants, although it is not clear from the paper how many of the mothers continued to take bromocriptine during nursing. The authors reported that there were no abnormal findings in any of the breastfed infants. In an unstated number of infants who had their serum prolactin measured, it took 6 to 9 weeks for their elevated serum prolactin levels to return to baseline values.[10]

A mother who was receiving bromocriptine (dosage not stated) for hyperprolactinemia from a pituitary macroadenoma breastfed her infant partially for 2 days and then exclusively from the third day onward (duration not stated). The infant had no observable side effects. She had regained her birthweight on day 10 and had gained weight adequately at 5 months.[11]

### Effects on Lactation and Breastmilk

With doses of 2.5 mg 1 to 3 times daily (usually twice daily), there is a marked reduction in serum prolactin, no increase in serum prolactin following nipple stimulation and little or no breast engorgement. Treatment is usually given for 14 days. A meta-analysis of published studies found evidence that bromocriptine is more effective than placebo for lactation suppression during the first week postpartum, but evidence is insufficient to comment on the acceptability of such therapy.[12] Rebound lactation after cessation of therapy may be controlled with a dose of 2.5 mg once daily for 1 additional week.[13]

Bromocriptine also prevents puerperal fever caused by either breast engorgement or infection among women who do not nurse their newborn infants.[14] The indication of postpartum breast engorgement was removed in the United States in 1994 because of serious maternal toxicity, including stroke (some fatal), convulsions, myocardial infarction (some fatal) and severe hypertension. One study found that seizure risk was decreased in the early puerperium, but increased slightly later.[15] Cerebral angiopathy, stroke and seizures continue to be reported from countries where bromocriptine is still used to suppress lactation.[16-18]

An early double-blind study in 60 women who were less than 24 hours postpartum found bromocriptine to be as effective as diethylstilbestrol in suppressing postpartum lactation. Bromocriptine was given in a dosage of 5 mg twice daily for 6 days followed by 5 mg three times daily for 3 days. Diethylstilbestrol dosage was 20 mg twice daily for 3 days, followed by 10 mg twice daily for 3 days, then 10 mg daily for 3 days.[19]

Hyperprolactinemia and galactorrhea have been reported occasionally after withdrawal of long-term therapy with high doses (5 to 10 mg 3 times daily) of bromocriptine for treatment of parkinsonism.[20]

In women given bromocriptine immediately postpartum, the composition of milk is altered from the milk of normal lactation. Most protein constituents (e.g., total protein, albumin, alpha-lactalbumin, lactoferrin, IgA and IgG) appear in higher concentrations than normal, similar to those of colostrum. Lactose levels are suppressed.[21]

A study in 14 women who were overproducing milk on day 3 postpartum found that oral bromocriptine 2.5 mg once daily for 3 days reduced serum prolactin to subnormal levels, but rebounded to control levels by 36 hours after the last dose. In contrast, the milk yield decreased by 25% from baseline and the decrease persisted for at least 12 days after the last dose.[9]

A woman who was treated with bromocriptine 5 mg daily for the amenorrhea-galactorrhea syndrome during pregnancy continued taking the drug in the same dosage after delivery and successfully breastfed her infant.[22]

In a case series of 40 women with pituitary adenoma and hyperprolactinemia, 30 of the women took bromocriptine 2.5 or 5 mg daily during pregnancy. Thirty of the 40 women were able to breastfeed successfully, although it is not clear from the paper how many of the mothers continued to take bromocriptine during nursing.[10]

A mother who was receiving bromocriptine (dosage not stated) for hyperprolactinemia from a pituitary macroadenoma successfully breastfed her infant partially for 2 days and exclusively from the third day postpartum onward (total duration not stated). She received support from professionals and a relative who was nursing.[11]

A mother with a prolactinoma took bromocriptine during pregnancy and postpartum. She was able to breastfeed her infant.[23]

### Alternate Drugs to Consider

(Lactation Suppression; Hyperprolactinemia) Cabergoline

### References

1 Bernard N, Jantzem H, Becker M, . Severe adverse effects of bromocriptine in lactation inhibition: A pharmacovigilance survey. BJOG 2015;122:1244-51.25761676
2 Fedrizzi S, Sassier M, Nee E. Puerperal psychosis after use of bromocriptine for stopping breast milk production. Fundam Clin Pharmacol 2015;29 (Suppl 1):7-8. doi:10.1111/fcp.12107
3 Marcellin L, Chantry AA. Breast-feeding (part II): Lactation inhibition-Guidelines for clinical practice. J Gynecol Obstet Biol Reprod (Paris) 2015;44:1080-3.26527027
4 Snellen M, Power J, Blankley G, . Pharmacological lactation suppression with D2 receptor agonists and risk of postpartum psychosis: A systematic review. Aust N Z J Obstet Gynaecol 2016;56:336-40.27297803
5 Johnson HM, Eglash A, Mitchell KB, . ABM Clinical Protocol #32: Management of hyperlactation. Breastfeed Med 2020;15:129-34.32031417
6 Sinkey R, Ye Y, Ryan KJ, . Pharmacokinetics of oral bromocriptine in postpartum patients. Pregnancy (Hoboken) 2026;2:e70199.42597111
7 Yang EJ, Lee KT, Pyon JK, . Treatment algorithm of galactorrhea after augmentation mammoplasty. Ann Plast Surg 2012;69:247-9.22214792
8 Lee MS, Song HC, An H, . Effect of bromocriptine on antipsychotic drug-induced hyperprolactinemia: Eight-week randomized, single-blind, placebo-controlled, multicenter study. Psychiatry Clin Neurosci 2010;64:19-27.19968833
9 Peters F, Geisthovel F, Breckwoldt M. Serum prolactin levels in women with excessive milk production. Normalization by transitory prolactin inhibition. Acta Endocrinol (Copenh) 1985;109:463-6.3898690
10 Cheng W, Zhang Z. Management of pituitary adenoma in pregnancy. Zhonghua Fu Chan Ke Za Zhi 1996;31:537-9.9275425
11 Verma S, Shah D, Faridi MM. Breastfeeding a baby with mother on bromocriptine. Indian J Pediatr 2006;73:435-6.16741332
12 Oladapo OT, Fawole B. Treatments for suppression of lactation. Cochrane Database Syst Rev 2012;9:CD005937.
13 Rolland R. Use of bromocriptine in the inhibition of puerperal lactation. Drugs 1979;17:326-36.378648
14 Almeida OD, Jr, Kitay DZ. Lactation suppression and puerperal fever. Am J Obstet Gynecol 1986;154:940-1.3963089
15 Rothman KJ, Funch DP, Dreyer NA. Bromocriptine and puerperal seizures. Epidemiology 1990;1:232-8.2081258
16 Comabella M, Alvarez-Sabin J, Rovira A, . Bromocriptine and postpartum cerebral angiopathy: A causal relationship? Neurology 1996;46:1754-6.8649587
17 Burckard E, Patrigeon RG, Felten D, . Convulsions due to a postpartum cerebral angiopathy associated with the administration of bromocriptine. Ann Fr Anesth Reanim 2003;22:46-9.
18 Barroso B, Bigou P, Martin K, . Reversible postpartum cerebral angiopathy associated with bromocriptine therapy. Rev Neurol (Paris) 2004;160:1191-3.15602366
19 Varga L, Lutterbeck PM, Pryor JS, . Suppression of puerperal lactation with an ergot alkaloid: A double-blind study. Br Med J 1972;2:743-4.4556543
20 Pentland B, Sawers JS. Galactorrhoea after withdrawal of bromocriptine. Br Med J 1980;281:716.7191752
21 Kulski JK, Hartmann PE, Martin JD, . Effects of bromocriptine mesylate on the composition of the mammary secretion in non-breast-feeding women. Obstet Gynecol 1978;52:38-42.355958
22 Canales ES, García IC, Ruíz JE, . Bromocriptine as prophylactic therapy in prolactinoma during pregnancy. Fertil Steril 1981;36:524-6.7286276
23 Liu X, Liu Y, Gao J, . Combination treatment with bromocriptine and metformin in patients with bromocriptine-resistant prolactinomas: A pilot study. World Neurosurg 2018;115:94-8.29530699

## Substance Identification

### Substance Name

Bromocriptine

### CAS Registry Number

25614-03-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiparkinson Agents

Dopamine Agonists

Ergot Alkaloids